# Efgartigimod Alfa

CASRN: 1821402-21-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of efgartigimod alfa during breastfeeding. Because efgartigimod alfa is a large protein molecule with a molecular weight of 54,000 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. Until more data become available, efgartigimod alfa should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Krysko KM, Dobson R, Alroughani R, et al. (2023). Family planning considerations in people with multiple sclerosis. Lancet Neurol.

## Substance Identification

### Substance Name

Efgartigimod Alfa

### CAS Registry Number

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized